# Vilanterol

CASRN: 503068-34-6

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published data exist on the use of vilanterol during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1] Vilanterol is available only in combination products such as Breo Ellipta and Anoro Ellipta. The authors of several reviews agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[2-4] Combination products such as Breo Ellipta and Anoro Ellipta are likely to be acceptable for similar reasons.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Formoterol, Salmeterol

### References

1 Lindberg C, Boréus L, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91.6586490
2 McDonald C, Burdon J. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8.8937369
3 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8.11254828
4 Taddio A, Ito S. Drugs and breast-feeding. In, Koren G, ed. Maternal-fetal toxicology. A clinician's guide. 3rd ed. New York. Marcel Dekker. 2001:177-32.

## Substance Identification

### Substance Name

Vilanterol

### CAS Registry Number

503068-34-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Beta Adrenergic Agonists

Bronchodilator Agents